# Atenolol

CASRN: 29122-68-7

## Drug Levels and Effects

### Summary of Use during Lactation

Because of atenolol's relatively extensive excretion into breastmilk in the newborn period and its extensive renal excretion, other agents are preferred while nursing a newborn or preterm infant or with high maternal dosages.[1,2] Infants older than 3 months of age appear to be at little risk of adverse effects from atenolol in breastmilk. Timing breastfeeding with respect to the time of the atenolol dose appears to be of little benefit in reducing infant atenolol exposure because it has a long half-life and the time of the peak level in milk is unpredictable.[3]

### Drug Levels

The excretion of beta-adrenergic blocking drugs into breastmilk is largely determined by their protein binding. Those with low binding such as atenolol at 10% are more extensively excreted into breastmilk. Accumulation of the drugs in the infant is related to the fraction excreted in urine. With 85% renal excretion, atenolol presents a high risk for accumulation in infants, especially neonates.

Maternal Levels. The time of the peak milk level of atenolol varied between 2 and 8 hours after the dose in 5 women.[4-6] In one woman a peak level of 1.6 mg/L occurred 4 hours after a single 50 mg dose.[5] After a single dose of 100 mg of atenolol in 4 women 4 to 12 days postpartum, peak milk levels ranged from 1.4 to 2.1 mg/L.[6] In 6 women taking atenolol 100 mg daily, two milk samples were taken in one day at unstated times after the dose. Milk levels ranged from 0.025 to 2.1 mg/L (average 0.7 mg/L).[7]

In a study of 5 early postpartum women, single milk levels taken 2 hours after a dose ranged from 0.38 to 1.04 mg/L (average 0.63 mg/L) with a dosage of 100 mg daily.[8] Because of the single early sample taken, these probably do not represent the peak milk levels in these women. Another woman taking atenolol 50 mg twice daily had an atenolol milk levels of 469 mcg/L 1.5 hours after a dose which probably does not represent the peak milk level.[9] It is estimated that a fully breastfed infant would receive between 5.7 and 19.2% of the maternal weight-adjusted dosage of atenolol.[10]

Nine women taking atenolol in dosages ranging between 25 and 200 mg daily (average not stated) in 2 divided doses had milk atenolol levels averaging 464 mcg/L at 2 hours after a dose. There was a 53% coefficient of variation in the levels measured, in part due to the wide range of dosages.[11]

Breastfeeding women taking oral atenolol for hypertension were studied during 3 time periods: 2-4 weeks postpartum, 3-4 months postpartum and 6-8 months postpartum. Seventeen women were evaluated at all time periods, 22 at the two earlier times, and 32 at 2-4 weeks postpartum. The excretion of atenolol into breastmilk decreased over time, with the average weight-adjusted percentages of maternal dosage of 9%, 5.1% and 3.2% at the 3 time periods, respectively. The highest percentages in individual infants were 34.8% at 2-4 weeks and 17.8% at 3-4 months of age. The absolute dose that breastfed infants received were proportional to the maternal dosage. Peak concentrations of atenolol in breastmilk occurred at an average of 4.4 hours after the dose, but in some individuals, the peak concentration occurred as late as 12 hours after the previous dose just before the next dose.[3]

Three nursing mothers who were 1 to 4.25 months postpartum and taking atenolol for hypertension each provided 8 milk samples over a 12- to 24-hour period. Their dosages were 100 mg each night, 25 mg twice daily and 25 mg daily. Peak milk concentrations occurred 4 hours after the dose in the women taking the drug once daily. Milk levels were relatively constant in the woman taking the drug twice daily. Average milk concentrations were 1.348 mg/L with 100 mg daily, 0.8 mg/L with 50 mg daily, and 0.35 mg/L with 25 mg daily. The weight-adjusted percentages of maternal dosage ranged from 14% to 18%.[12]

Infant Levels. After a single 50 mg maternal atenolol dose, the serum level in one 2-week-old infant was undetectable (<10 mcg/L) 4 hours after nursing when the milk concentration was 1.8 mg/L.[5] Another 2-week-old infant had serum levels of 0, 0 and 69 mcg/L just prior to nursing at three times: before, 2.25 hours and 6.25 hours after the maternal dose of atenolol 100 mg daily.[13,14]

One infant had undetectable (assay limits not stated) whole blood and plasma levels of atenolol at 3 and 8 days of age, respectively, with a maternal dose of 100 mg daily, although sampling times were not stated.[15] In 3 infants, atenolol serum levels ranged from undetectable (<27 mcg/L) to 116 mcg/L 4 and 8 hours after a 100 mg maternal dose of atenolol.[6]

In one 10-day-old infant with symptoms of beta-blockade, serum atenolol levels were 2 mg/L 48 hours after the last nursing and 0.14 mg/L 72 hours after nursing was discontinued. The infant's mother was taking atenolol 50 mg twice daily.[9]

Urine atenolol levels of 20, 30 and 435 mcg/L were found in 3 infants whose mothers were taking 100 mg daily.[7,16] In another 8-day-old breastfed infant, a urine atenolol level of 440 mcg/L was measured during maternal use of atenolol 100 mg daily.[15]

Atenolol serum concentrations were below the lower limit of the assay (10 mcg/L) in 22 breastfed (extent not stated) infants aged 3 to 4 months whose mothers were taking atenolol in an average oral dosage of 49 mg daily.[3]

A 4.25-month-old infant was breastfed (extent not stated) by a mother who was taking atenolol 100 mg daily at bedtime. Simultaneous maternal and infant blood samples were obtained (time with respect to dose not stated). The infant's plasma level was 18.9% of the mother's plasma level.[12]

A physiologically based pharmacokinetic model was developed for atenolol. The model predicted observed milk levels fairly well. Milk pH greatly affected the excretion of atenolol into milk, with atenolol milk excretion decreasing with increasing pH. The model predicted a relative infant dose range of 3.4 to 10.56%.[17]

### Effects in Breastfed Infants

A study of mothers taking beta-blockers during nursing found a numerically, but not a statistically significantly increased number of adverse reactions in those taking any beta-blocker. Although the ages of infants were matched to control infants, the ages of the affected infants were not stated. Of 13 mothers taking atenolol, one reported lethargy in her breastfed infant; she was also taking other unspecified drugs for hypertension.[18]

Cyanosis, bradycardia and hypothermia occurred in a 5-day-old infant probably because of atenolol in breastmilk. Her mother was taking atenolol 50 mg twice daily. Symptoms continued until day 8 when breastfeeding was discontinued.[9]

No difference between resting and crying heart rates were observed in 22 breastfed (extent not stated) infants aged 3 to 4 months whose mothers were taking atenolol in an average oral dosage of 49 mg daily. This finding indicated that the infants were experiencing no beta-adrenergic blockade from atenolol in breastmilk.[3]

Other authors have reported 15 infants aged 3 days to 2 weeks exposed to atenolol in breastmilk with no signs of adverse effects. Maternal dosages were 50 or 100 mg daily.[5-7,13,15,16,19]

### Effects on Lactation and Breastmilk

One unusual case of oligomenorrhea, hyperprolactinemia and galactorrhea was reported in a 38-year-old woman who had been taking atenolol for about 18 months. Prolactin values returned to normal within 3 days of discontinuation of atenolol. Galactorrhea slowly lessened and disappeared one month after atenolol discontinuation.[20]

### Alternate Drugs to Consider

Propranolol, Labetalol, Metoprolol

### References

1 Eidelman AI, Schimmel MS. Drugs and breast milk. Pediatrics 1995;95:956–7.7761234
2 Hale TW. Medications in breastfeeding mothers of preterm infants. Pediatr Ann 2003;32:337–47.12774709
3 Eyal S, Kim JD, Anderson GD, et al. Atenolol pharmacokinetics and excretion in breast milk during the first 6 to 8 months postpartum. J Clin Pharmacol 2010;50:1301–9.20145263
4 Riant P, Urien S, Albengres E, et al. High plasma protein binding as a parameter in the selection of betablockers for lactating women. Biochem Pharmacol 1986;35:4579–81.2878668
5 White WB, Andreoli JW, Wong SH, et al. Atenolol in human plasma and breast milk. Obstet Gynecol 1984;63 (Suppl):42S–4S.6700880
6 Kulas J, Lunell NO, Rosing U, et al. Atenolol and metoprolol. A comparison of their excretion into human breast milk. Acta Obstet Gynecol Scand Suppl 1984;118:65–9.6587730
7 Bhamra RK, Thorley KJ, Vale JA, et al. High-performance liquid chromatographic measurement of atenolol: Methodology and clinical applications. Ther Drug Monit 1983;5:313–8.6636259
8 Thorley KJ, McAinsh J. Levels of the beta-blockers atenolol and propranolol in the breast milk of women treated for hypertension in pregnancy. Biopharm Drug Dispos 1983;4:299–301.6626704
9 Schimmel MS, Eidelman AI, Wilschanski MA, et al. Toxic effects of atenolol consumed during breast feeding. J Pediatr 1989;114:476–8.2921694
10 Atkinson HC, Begg EJ, Darlow BA. Drugs in human milk: Clinical pharmacokinetic considerations. Clin Pharmacokinet 1988;14:217–40.3292101
11 Hebert MF, Carr DB, Anderson GD, et al. Pharmacokinetics and pharmacodynamics of atenolol during pregnancy and postpartum. J Clin Pharmacol 2005;45:25–33.15601802
12 Lwin EMP, Gerber C, Leggett C, et al. Estimation of atenolol transfer into milk and infant exposure during its use in lactating women. J Hum Lact 2018;34:592–9.29870669
13 Liedholm H, Melander A, Bitzén PO, et al. Accumulation of atenolol and metoprolol in human breast milk. Eur J Clin Pharmacol 1981;20:229–31.7286041
14 Liedholm H. Transplacental passage and breast milk accumulation of atenolol in humans. Drugs 1983;25:217–8. doi:10.2165/00003495-198300252-00064
15 Fowler MB, Brudenell M, Jackson G, et al. Essential hypertension and pregnancy: Successful outcome with atenolol. Br J Clin Pract 1984;38:73–4.6704301
16 Holt DW, Bhamra R, Thorley KJ, et al. High performance liquid chromatographic measurement of atenolol: Placental transfer and expression in breast milk. Br J Clin Pharmacol 1982;14:148P–9P. PMC1427566
17 Kayesh R, Pressly M, Guinn D, et al. Application of lactation physiologically based pharmacokinetic modeling to predict milk exposure of passively diffused drugs. J Clin Pharmacol 2025;65:1637–49.40853187
18 Ho TK, Moretti ME, Schaeffer JK, et al. Maternal beta-blocker usage and breast feeding in the neonate. Pediatr Res 1999;45 (4, pt. 2):67A. doi:10.1203/00006450-199904020-00402
19 Liedholm H, Wåhlin-Boll E, Hanson A, et al. Transplacental passage and breast milk concentration of hydralazine. Eur J Clin Pharmacol 1982;21:417–9.7200428
20 Lee ST. Hyperprolactinemia, galactorrhea, and atenolol. Ann Intern Med 1992;116:522.1739249

## Substance Identification

### Substance Name

Atenolol

### CAS Registry Number

29122-68-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Adrenergic Beta-Antagonists

Antiarrhythmics